# Procaine

CASRN: 59-46-1

## Drug Levels and Effects

### Summary of Use during Lactation

The term "Novocaine" (an old procaine brand name) is often equated to local anesthetic. The exact identity of any local anesthetic should be verified, especially since procaine is no longer marketed in in the US as a single ingredient product. No information is available on the use of procaine during breastfeeding. Based on the short half-life of procaine in the plasma and the low excretion of other local anesthetics into breastmilk, a single dose of procaine during breastfeeding is unlikely to adversely affect the breastfed infant. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Lidocaine, Ropivacaine

## Substance Identification

### Substance Name

Procaine

### CAS Registry Number

59-46-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anesthetics, Local